# Regadenoson

CASRN: 313348-27-5

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of regadenoson during breastfeeding. To avoid exposure of the infant to regadenoson, nursing mothers should avoid breastfeeding for 10 hours after drug administration.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Regadenoson

### CAS Registry Number

313348-27-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Adenosine A2 Receptor Agonists

Diagnostic Agents

Purines

Pyrazoles